# Dyclonine

CASRN: 586-60-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dyclonine during breastfeeding. Topical dyclonine products should be wiped off thoroughly prior to nursing if they are applied to the breast or nipple area. Topical dyclonine is relatively safe, but allergic contact dermatitis has been reported following dyclonine use, so it is best kept away from the infant’s skin.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dyclonine

### CAS Registry Number

586-60-7

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local